# Intrauterine Levonorgestrel

CASRN: 797-63-7

## Drug Levels and Effects

### Summary of Use during Lactation

This record contains information specific to the levonorgestrel intrauterine device (IUD). Although nonhormonal methods are preferred during breastfeeding, progestin-only contraceptives such as levonorgestrel are considered the hormonal contraceptives of choice during lactation. Fair quality evidence indicates that levonorgestrel does not adversely affect the composition of milk, the growth and development of the infant or the milk supply. Expert opinion and a metanalysis hold that the risks of progestin-only contraceptive products usually are acceptable for nursing mothers at any time postpartum.[1-5] There are no reports of adverse effects in breastfed infants with maternal use of progestin-only contraceptives. Low quality evidence indicates that there may be no difference in breastfeeding rates at 6 months between immediate and delayed insertion of progestin-releasing IUDs.[6] Some evidence indicates that progestin-only contraceptives may offer protection against bone mineral density loss during lactation, or at least do not exacerbate it.[7-9]

The World Health Association recommends that progestin-only intrauterine devices (IUDs) can be inserted before 48 hours postpartum and after 4 weeks postpartum, but should not be inserted between 48 hours and 4 weeks postpartum.[1] Other guidelines and product labeling consider delayed postpartum insertion acceptable if immediate insertion is not feasible.[3] Four small, randomized studies on this point differed in their outcomes. Three found that early insertion did not adversely affect breastfeeding,[10-12] and the other found that immediate IUD insertion markedly reduced the breastfeeding rate at 6 months postpartum.[13] A meta-analysis found that uterine perforation with IUD insertion was 6 to 7% times in breastfeeding mothers, but that the risk of expulsion and adverse events was no greater in breastfeeding mothers.[14] More recent prospective studies found an increase in the risk of expulsion of intrauterine devices with breastfeeding,[11,15] while a large retrospective study found a 29% lower risk of expulsion in breastfeeding women.[16]

### Drug Levels

Levonorgestrel is a synthetic progestin that is the active isomer of the racemate norgestrel. It is considered to be twice as potent on a weight basis as the racemic mixture.

Maternal Levels. Ten women had IUDs that released either 10 mg or 30 mcg of levonorgestrel daily placed at 6 weeks postpartum. Milk was analyzed for levonorgestrel at various times over a 12-month period. All milk levels were less than 0.1 mcg/L, regardless of the dose that the mother was receiving.[17]

A study of levonorgestrel IUDs compared levonorgestrel milk levels in women who had the IUD placed either within 30 minutes of delivery (immediate: n = 12) or at 4 to 8 weeks postpartum (delayed: n = 10). At 4 to 8 weeks postpartum, the median milk levonorgestrel level in the immediate group was 32.5 ng/L and the median in the delayed group’s milk levels was 17.5 ng/L before IUD placement. Four weeks later, the two groups had similar median levels: 26.2 ng/L in the immediate group and 28 ng/L in the delayed group. It was not clear why the delayed group had measurable levonorgestrel levels before having the IUD placed. Measurements of milk creamatocrit found no effect of levonorgestrel on milk fat.[18]

Infant Levels. A study compared women who received levonorgestrel as a contraceptive via Norplant-2 (n = 14), an IUD that released 20 mcg daily (n = 14) or oral tablets containing 30 mcg of levonorgestrel (n = 10) at 4 to 6 weeks postpartum. The levonorgestrel serum levels averaged 0.03 mcg/L in infants whose mothers used the IUD. Infant serum levels averaged 6.7% of maternal serum levels.[19]

### Effects in Breastfed Infants

One study found serum thyroid stimulating hormone levels to be lower in the infants exposed to levonorgestrel than in control infants.[20]

IUDs that released levonorgestrel were inserted 6 weeks after delivery. IUDs released 10 mcg per day (n = 30) or 30 mcg per day (n = 40); copper-releasing IUDs (n = 40) were used as controls. No differences were seen in infant height, weight, development, respiratory infections or blood chemistries up to 12 months of age between the levonorgestrel and copper IUD groups.[21]

Three hundred twenty lactating women were randomized to either an IUD containing levonorgestrel (Mirena; n = 163) or the copper-containing IUD Cu T380A group (n = 157). Follow-up of infants for 1 year found no differences in growth and development or in duration of breastfeeding.[22]

### Effects on Lactation and Breastmilk

IUDs releasing levonorgestrel were inserted 6 weeks after delivery. IUDs released 10 mcg per day (n = 30) or 30 mcg per day (n = 40); copper-releasing IUDs (n = 40) were used as controls. The rate of breastfeeding discontinuation was higher with the levonorgestrel groups than in the copper IUD group at 75 days, but not at other times.[21]

In a small prospective study, forty-six women were randomized to have an IUD containing levonorgestrel (Mirena) inserted either within 10 minutes after placental delivery (n = 15), between 10 minutes and 48 hours after placental delivery (n = 15), or after 6 weeks postpartum (n = 16). At 6 months postpartum, no statistical difference in the rates of continued breastfeeding (extent not stated) was found among the groups.[10]

Women who gave birth were offered contraception with a levonorgestrel-containing IUD and randomized to have the IUD placed immediately following delivery (n = 46) or at 6 to 8 weeks postpartum (n = 50). Women randomized to later IUD insertion were more likely to be nursing at 6 months postpartum (24% vs 6%) and tended to have a longer median duration of exclusive breastfeeding.[13]

A noninferiority trial compared breastfeeding in women who received a levonorgestrel IUD (product and dose not specified) immediately postpartum (n = 132) or at 8 weeks postpartum (n = 127). At 8 weeks, women who received the IUD immediately postpartum had a 5% lower rate of any breastfeeding (79% vs 84%), which fell withing the predetermined 15% noninferiority margin. Exclusive breastfeeding was slightly lower at 8 weeks in the immediate group (33% vs 40%), but the difference was not statistically significant. The time to lactogenesis in the immediate group was noninferior to that of the delayed group (65.3 vs 63.6 hours). Twenty-four device expulsions occurred in the immediate group compared to 2 in the delayed group (19% vs 2%), which was statistically significant.[11]

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Medroxyprogesterone Acetate, Norethindrone

### References

1 World Health Organization. Medical Eligibility Criteria For Contraceptive Use: Fifth Ed. 2015.https://www.who.int/publications/i/item/9789241549158
2 American College of Obstetrics and Gynecology. Committee Opinion No. 670: Immediate Postpartum Long-Acting Reversible Contraception. Obstet Gynecol 2016;128:e32-7 27454734
3 Vricella LK, Gawron LM, Louis JM. Society for Maternal-Fetal Medicine (SMFM) Consult Series #48: Immediate postpartum long-acting reversible contraception for women at high-risk for medical complications. Am J Obstet Gynecol 2019;220:B2-B12 30738885
4 Abdelhakim AM, Sunoqrot M, Amin AH, et al. The effect of early vs. delayed postpartum insertion of the LNG-IUS on breastfeeding continuation: A systematic review and meta-analysis of randomised controlled trials. Eur J Contracept Reprod Health Care 2019;24:327-36 31517549
5 Nguyen AT, Curtis KM, Tepper NK, et al. U.S. Medical Eligibility Criteria for Contraceptive Use, 2024. MMWR Recomm Rep 2024;73:1-126 39106314
6 Sothornwit J, Kaewrudee S, Lumbiganon P, et al. Immediate versus delayed postpartum insertion of contraceptive implant and IUD for contraception. Cochrane Database Syst Rev 2022;10:Cd011913 36302159
7 Caird LE, Reid-Thomas V, Hannan WJ, et al. Oral progestogen-only contraception may protect against loss of bone mass in breast-feeding women. Clin Endocrinol (Oxf) 1994;41:739-45 7889609
8 Díaz S, Reyes MV, Zepeda A, et al. Norplant((R)) implants and progesterone vaginal rings do not affect maternal bone turnover and density during lactation and after weaning. Hum Reprod 1999;14:2499-505 10527977
9 Costa ML, Cecatti JG, Krupa FG, et al. Progestin-only contraception prevents bone loss in postpartum breastfeeding women. Contraception 2012;85:374-80 22036473
10 Dahlke JD, Terpstra ER, Ramseyer AM, et al. Postpartum insertion of levonorgestrel--intrauterine system at three time periods: A prospective randomized pilot study. Contraception 2011;84:244-8 21843688
11 Turok DK, Leeman L, Sanders JN, et al. Immediate postpartum levonorgestrel intrauterine device insertion and breast-feeding outcomes: A noninferiority randomized controlled trial. Am J Obstet Gynecol 2017;217:665.e1-.e8
12 Levi EE, Findley MK, Avila K, et al. Placement of levonorgestrel intrauterine device at the time of cesarean delivery and the effect on breastfeeding duration. Breastfeed Med 2018;13:674-9 30376369
13 Chen BA, Reeves MF, Creinin MD, et al. Postplacental or delayed levonorgestrel intrauterine device insertion and breast-feeding duration. Contraception 2011;84:499-504 22018124
14 Ti A, Ayieko S, Gaffield ME, et al. The safety of intrauterine devices during breastfeeding: An updated systematic review. BMJ Sex Reprod Health 2025;51 (Suppl 1):s18-s29 41184154
15 Eggebroten JL, Sanders JN, Turok DK. Immediate postpartum intrauterine device and implant program outcomes: A prospective analysis. Am J Obstet Gynecol 2017;217:51.e1-7 28342716
16 Armstrong MA, Raine-Bennett T, Reed SD, et al. Association of the timing of postpartum intrauterine device insertion and breastfeeding with risks of intrauterine device expulsion. JAMA Netw Open 2022;5:e2148474 35226086
17 Heikkilä M, Haukkamaa M, Luukkainen T. Levonorgestrel in milk and plasma of breast-feeding women with a levonorgestrel-releasing IUD. Contraception 1982;25:41-9 6800691
18 Hopelian NG, Simmons RG, Sanders JN, et al. Comparison of levonorgestrel level and creamatocrit in milk following immediate versus delayed postpartum placement of the levonorgestrel IUD. BMC Womens Health 2021;21:33 33478494
19 Shikary ZK, Betrabet SS, Patel ZM, et al. ICMR task force study on hormonal contraception. Transfer of levonorgestrel (LNG) administered through different drug delivery systems from the maternal circulation into the newborn infant's circulation via breast milk. Contraception 1987;35:477-86 3113823
20 Bassol S, Nava-Hernandez MP, Hernandez-Morales C, et al. Effects of levonorgestrel implant upon TSH and LH levels in male infants during lactation. Int J Gynaecol Obstet 2002;76:273-7 11880130
21 Heikkilä M, Luukkainen T. Duration of breast-feeding and development of children after insertion of a levonorgestrel-releasing intrauterine contraceptive device. Contraception 1982;25:279-92 6804164
22 Shaamash AH, Sayed GH, Hussien MM, et al. A comparative study of the levonorgestrel-releasing intrauterine system Mirena(R) versus the Copper T380A intrauterine device during lactation: breast-feeding performance, infant growth and infant development. Contraception 2005;72:346-51 16246660

## Substance Identification

### Substance Name

Intrauterine Levonorgestrel

### CAS Registry Number

797-63-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents, Female

Contraceptives, Oral, Synthetic